# Chocolate

CASRN: 84649-99-0

## Drug Levels and Effects

### Summary of Use during Lactation

Chocolate contains small amounts of caffeine and larger amounts of the closely related compound, theobromine. It also contains anandamide and two related compounds that stimulate cannabinoid receptors, tryptophan, and polyphenols.[1,2] All of these compounds are detectable in breastmilk in small amounts. Low intake of chocolate by a nursing mother is not problematic, but extreme amounts can affect the infant.

Cacao butter, which is derived from Theobroma cacao, was found to be superior to mother’s milk when applied to the nipples during the first 10 days postpartum. Nipple pain, rashes, and cracks were less frequent in the cacao butter group.[3]

### Drug Levels

Maternal Levels. Six nursing mothers ingested 113 grams of Hershey's milk chocolate containing 240 mg of theobromine. Peak milk theobromine levels averaging 5.3 mg/L occurred at an average of 2.7 hours (range 2.1 to 3.3 hours) after ingestion. The authors estimated that if a woman ate a 4 ounce chocolate bar every 6 hours and her infant ingested 1 liter of milk daily, nursing when the concentration of theobromine in milk was at a peak, the infant could be exposed to about 10 mg theobromine or about 1 to 2 mg/kg daily.[4]

Two lactating women collected milk with a pump for 12 hours following ingestion of chocolate containing 80 mg of flavan-3-ols (polyphenols) of which 39 mg was epicatechin. The mothers excreted 0.0048% of the dose of epicatechin as epicatechin and its metabolites. In 11 other mothers who had a varied and uncontrolled diet, cocoa and cocoa products provided 30% of the flavan-3-ols and about 40% of the epicatechin consumed in their usual diet. In 8 of these mothers, 10 mg of flavan-3-ols were excreted into colostrum daily of which 5 mg was epicatechin. In the 11 women, mature milk contained 5.9 mg of flavan-3-ols of which 2.7 mg was epicatechin.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Jitteriness in a 6-week-old breastfed infant reported by a mother who claimed to drink 4 to 5 cups of coffee and 2 to 3 bottles (about 480 mL each) of cola daily as well as occasional tea and cocoa. Upon examination, the infant was gaining weight appropriately, but had trembling and increased muscle tone. The infant's symptoms decreased markedly 2 weeks after his mother stopped all caffeine-containing beverages.[5]

A newborn infant developed irritability and jitteriness at 12 hours of life. All laboratory values were normal. The symptoms continued of the following days, accompanied by inconsolable crying, excessive sucking and sleep disturbances. Treatment with phenobarbital for 1 week did not modify symptoms. The mother did not drink coffee, but was eating about 250 grams of cocoa and chocolate daily during pregnancy and nursing. She tapered her chocolate intake over 10 days and symptoms in the infant began to diminish. Behavior was normal by 40 days of age and at 8 months of age, psychomotor development was normal.[6]

A group of dermatologists in Japan reported that of 92 exclusively breastfed infants with atopic dermatitis that they tested, 18 had positive challenges to chocolate.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Manganaro R, Marseglia L, Mami C, et al. What risk for newborn infant of chocoholic mother? Agro Food Industry Hi-Tech 2007;18 (Suppl. S):13-4.
2 Khymenets O, Rabassa M, Rodríguez-Palmero M, et al. Dietary epicatechin is available to breastfed infants through human breast milk in the form of host and microbial metabolites. J Agric Food Chem 2016;64:5354-60.27285570
3 Can Gürkan Ö, Abbasoğlu D, Arslan Özkan H, et al. Cacao butter as prophylaxis for nipple problems: A pilot randomized controlled study. Breastfeed Med 2022;17:745-52.35881863
4 Resman BH, Blumenthal P, Jusko WJ. Breast milk distribution of theobromine from chocolate. J Pediatr 1977;91:477-80.894424
5 Rivera-Calimlim L. Drugs in breast milk. Drug Ther (NY) 1977;7:59-63.12336945
6 Cambria S, Manganaro R, Mami C, et al. Hyperexcitability syndrome in a newborn infant of chocoholic mother. Am J Perinatol 2006;23:421-2.17009197
7 Uenishi T, Sugiura H, Tanaka T, et al. Aggravation of atopic dermatitis in breast-fed infants by tree nut-related foods and fermented foods in breast milk. J Dermatol 2011;38:140-5.21269309

## Substance Identification

### Substance Name

Chocolate

### CAS Registry Number

84649-99-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Cocoa Plant

Cocoa Powder

Theobroma cacao